# Paclitaxel

CASRN: 33069-62-4

## Drug Levels and Effects

### Summary of Use during Lactation

Most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy.[1] It might be possible to breastfeed safely during intermittent therapy with an appropriate period of breastfeeding abstinence. Some have suggested a breastfeeding abstinence period of 6 to 10 days,[2] but more recent pharmacokinetic modeling using a worst-case scenario suggests that 6 days would be adequate to minimize both systemic and gut toxicity after the colostral phase.[3]

Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[4] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant than typical mothers.

### Drug Levels

Maternal Levels. A woman with a history of treatment for thyroid cancer and recurrence during pregnancy was treated postpartum with paclitaxel and carboplatin. Her intravenous paclitaxel dose was 56.1 mg (30 mg per square meter) weekly for 6 weeks. Whole milk samples were obtained at 4, 28, 172, and 316 hours after the sixth dose. The highest milk paclitaxel level was 1.17 mg/L in the 28-hour sample and paclitaxel was undetectable (<80 mcg/L) in the 316 hour sample. Metabolites were not measured. The authors calculated an average milk paclitaxel level over the 316 hour collection period of 0.78 mg/L, resulting in an estimated total weight-adjusted infant daily dose of 16.7% of the maternal weekly dose.[5] Note that the above estimate of the infant daily dose is expressed as percentage of the maternal weekly dose, and that authors used a level of zero as the trough milk level, rather than a milk level taken before the sixth dose (which would equal approximately the 172-hour level of 0.97 mg/L), resulting in an underestimate of the AUC and infant dose.

A 17-week pregnant woman with breast cancer received a regimen of fluorouracil, epirubicin and cyclophosphamide, followed by 9 weekly doses of paclitaxel 80 mg/sq. m. Her infant was delivered after the 6th dose of paclitaxel. She pumped milk and discarded it until after the 9th dose of paclitaxel when maternal blood and milk samples were collected. Paclitaxel concentration in milk was 111.4 mcg/L at 11 hours after the dose. Milk concentration decrease to 6.8 mcg/L at 27 hours after the dose. Milk paclitaxel levels were undetectable (<2.5 mcg/L) at 71.25 hours after the dose, and thereafter until 360 hours after the dose.[6]

A woman with breast cancer diagnosed during pregnancy received chemotherapy beginning a few days after delivery. It consisted of doxorubicin 118 mg and cyclophosphamide 1180 mg every 2 weeks for 4 cycles, followed by paclitaxel 156 mg weekly and carboplatin 900 mg every 4 weeks. She collected 97 milk samples over 3 cycles of chemotherapy. A selection of 26 samples were analyzed for paclitaxel. Milk levels increased with each dose, with peak levels ranging from 6 mcg/L after the first dose to 12.5 mcg/L after the second dose to about 20 mcg/L after the third dose. Milk levels dropped rapidly to less than 4 mcg/L by 2 days after the dose and to nearly 0 by 5 to 6 days after the dose. The authors calculated the times for the milk concentrations to reach various relative infant dosage (RID) levels. It took less than 1 day to fall below an RID of 1%. It took less than 1 day on the first two cycles and 1 day on the third cycle to fall below 0.1%, and 2 to 3 days to fall below 0.01%; however, potentially toxic metabolites were not measured.[7] A further pharmacokinetic analysis of all breastmilk samples found that paclitaxel levels in milk decrease rapidly and that milk need be discarded for 1 day or less after each dose in a cycle to achieve a cumulative relative infant dosage of <1%. However, this estimate did not include the presence of active metabolite(s) in milk, so this time represents the minimum time to withhold breastfeeding.[8]

The same authors developed a physiologically based pharmacokinetic model for paclitaxel. Assuming the worst-case scenario, the model predicted reductions of infant peripheral blood exposure of 71%, 86%, and 92% when milk was discarded for 1, 2, or 3 days after the maternal dose, respectively. In addition, the model predicted that it would take 6 days for the gut concentration to fall below the IC_50_ for cell death. However, these values apply only to mature milk and not necessarily to colostrum.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A telephone follow-up study was conducted on 74 women who received cancer chemotherapy at one center during the second or third trimester of pregnancy to determine if they were successful at breastfeeding postpartum. Only 34% of the women were able to exclusively breastfeed their infants, and 66% of the women reported experiencing breastfeeding difficulties. This was in comparison to a 91% breastfeeding success rate in 22 other mothers diagnosed during pregnancy, but not treated with chemotherapy. Other statistically significant correlations included: 1. mothers with breastfeeding difficulties had an average of 5.5 cycles of chemotherapy compared with 3.8 cycles among mothers who had no difficulties; and 2. mothers with breastfeeding difficulties received their first cycle of chemotherapy on average 3.4 weeks earlier in pregnancy. Of the 9 women who received a taxane-containing regimen, 7 had breastfeeding difficulties.[9]

### References

1 Pistilli B, Bellettini G, Giovannetti E, et al. Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207-11.23199900
2 Johnson HM, Mitchell KB. ABM clinical protocol #34: Breast cancer and breastfeeding. Breastfeed Med 2020;15:429-34.32516007
3 Damoiseaux D, Amant F, Beijnen JH, et al. Physiologically-based pharmacokinetic model to predict doxorubicin and paclitaxel exposure in infants through breast milk. CPT Pharmacometrics Syst Pharmacol 2023;12:1931-44.37798909
4 Urbaniak C, McMillan A, Angelini M, et al. Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24.25061513
5 Griffin SJ, Milla M, Baker TE, et al. Transfer of carboplatin and paclitaxel into breast milk. J Hum Lact 2012;28:457-9.23087196
6 Jackson CGCA, Morris T, Hung N, Hung T. Breast milk paclitaxel excretion following intravenous chemotherapy-a case report. Br J Cancer 2019;121:421-4.31363168
7 Damoiseaux D, Calpe S, Rosing H, et al. Presence of 5 chemotherapeutic drugs in breast milk as a guide for the safe use of chemotherapy during breastfeeding: Results from a case series. Clin Pharmacol Ther 2022;112:404-10.35486426
8 Damoiseaux D, Centanni D, Beijnen JH, et al. Predicting chemotherapy distribution into breast milk for breastfeeding women using a population pharmacokinetic approach. Clin Pharmacokinet 2023;62:969-80.37154994
9 Stopenski S, Aslam A, Zhang X, Cardonick E. After chemotherapy treatment for maternal cancer during pregnancy, is breastfeeding possible? Breastfeed Med 2017;12:91-7.28170295

## Substance Identification

### Substance Name

Paclitaxel

### CAS Registry Number

33069-62-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents, Phytogenic

Antimitotic Agents

Tubulin Modulators